# Gadopiclenol

CASRN: 933983-75-6

## Drug Levels and Effects

### Summary of Use during Lactation

Guidelines developed by several professional organizations state that breastfeeding need not be disrupted after a nursing mother receives a gadolinium-containing contrast medium.[1-3] However, because there is no published experience with gadopiclenol during breastfeeding, other agents may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Gadobutrol, Gadoteridol, Gadoterate

### References

1 Copel J, El-Sayed Y, Heine RP, et al. Committee Opinion No. 723: Guidelines for diagnostic imaging during pregnancy and lactation. Obstet Gynecol 2017;130:e210-e216.28937575
2 European Society of Urogenital Radiology. ESUR guidelines on contrast media. 2018;Version 10.0. http://www.esur-cm.org/index.php/en/
3 American College of Radiology Committee on Drugs and Contrast Media. Administration of contrast media to breast-feeding mothers. In, ACR manual on contrast media. 2022;Version 2022:106-7. https://www.acr.org/Clinical-Resources/Contrast-Manual

## Substance Identification

### Substance Name

Gadopiclenol

### CAS Registry Number

933983-75-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contrast Media

Diagnostic Agents